# Mepenzolate

CASRN: 25990-43-6

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of mepenzolate during breastfeeding. Because mepenzolate is a quaternary ammonium compound, it is not likely to be absorbed and reach the bloodstream of the infant. Long-term use of mepenzolate might reduce milk production or milk letdown. During long-term use, observe for signs of decreased lactation (e.g., insatiety, poor weight gain).

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Anticholinergics can inhibit lactation in animals, apparently by inhibiting growth hormone and oxytocin secretion.[1-5] Anticholinergic drugs can also reduce serum prolactin in nonnursing women.[6] The prolactin level in a mother with established lactation may not affect her ability to breastfeed.

### References

1 Aaron DK, Ely DG, Deweese WP, et al. (1997). Reducing milk production in ewes at weaning using restricted feeding and methscopolamine bromide. J Anim Sci.
2 Powell MR, Keisler DH. (1995). A potential strategy for decreasing milk production in the ewe at weaning using a growth hormone release blocker. J Anim Sci.
3 Daniel JA, Thomas MG, Powell MR, et al. (1997). Methscopolamine bromide blocks hypothalmic-stimulated release of growth hormone in ewes. J Anim Sci.
4 Bizzarro A, Iannucci F, Tolino A, et al. (1980). Inhibiting effect of atropine on prolactin blood levels after stimulation with TRH. Clin Exp Obstet Gynecol.
5 Svennersten K, Nelson L, Juvnäs-Moberg K. (1992). Atropinization decreases oxytocin secretion in dairy cows. Acta Physiol Scand.
6 Masala A, Alagna S, Devilla L, et al. (1982). Muscarinic receptor blockade by pirenzepine: Effect on prolactin secretion in man. J Endocrinol Invest.

## Substance Identification

### Substance Name

Mepenzolate

### CAS Registry Number

25990-43-6

### Drug Class

Breast Feeding

Lactation

Anti-Ulcer Agents

Muscarinic Antagonists

Parasympatholytics